# Fluoxetine

CASRN: 54910-89-3

## Drug Levels and Effects

### Summary of Use during Lactation

The average amount of drug in breastmilk is higher with fluoxetine than with most other SSRIs and the long-acting, active metabolite, norfluoxetine, is detectable in the serum of most breastfed infants during the first 2 months postpartum and in a few thereafter. Adverse effects such as colic, fussiness, and drowsiness have been reported in some breastfed infants. Decreased infant weight gain was found in one study, but not in others. No adverse effects on development have been found in infants followed for up to 5 years of age.

If fluoxetine is required by the mother, it is not a reason to discontinue breastfeeding. A safety scoring system finds fluoxetine use to be possible during breastfeeding,[1] although others do not recommend its use.[2] If the mother was taking fluoxetine during pregnancy or if other antidepressants have been ineffective, most experts recommend against changing medications during breastfeeding. Otherwise, agents with lower excretion into breastmilk may be preferred, especially while nursing a newborn or preterm infant. The breastfed infant should be monitored for behavioral side effects such as colic, agitation, irritability, poor feeding, and poor weight gain.

Mothers taking an SSRI during pregnancy and postpartum may have more difficulty breastfeeding, although this might be a reflection of their disease state.[3] These mothers may need additional breastfeeding support. Breastfed infants exposed to an SSRI during the third trimester of pregnancy are at risk for neonatal withdrawal syndrome consisting of hypoglycemia, tremors, tachycardia, or hypotonia, and might be at a greater risk of readmission due to jaundice.[4,5]

### Drug Levels

Fluoxetine is metabolized to norfluoxetine which has antidepressant activity that is considered to be equal to fluoxetine.[2]

Maternal Levels. In a pooled analysis of serum levels from published studies and 1 unpublished case, the authors found that 20 mothers taking an average daily dosage of 28 mg (range 10 to 80 mg) had an average milk fluoxetine level of 76 mcg/L (range 23 to 189 mcg/L).[6] Using the average dosage and milk level data from this paper, an exclusively breastfed infant would receive an estimated 2.4% of the maternal weight-adjusted dosage of fluoxetine; however, the substantial contribution of norfluoxetine was not considered. In one of the studies included in the pooled analysis that measured both fluoxetine and norfluoxetine in 14 mothers, the average daily infant dosage in breastmilk was about 7% (range 3 to 12%) of the mother’s weight-adjusted dosage.[6]

Eleven women taking fluoxetine 20 to 40 mg daily during pregnancy and lactation had trough milk fluoxetine and norfluoxetine levels measured on day 4, week 2 and month 2 postpartum. When standardized to a 20 mg daily dosage, total drug concentration in breastmilk ranged from 75.4 to 91.5 mcg/L at the 3 times. The authors estimated that an exclusively breastfed infant would receive a minimum of 2.4% and 3.8% of the maternal weight-adjusted dosage of the drug and metabolite combined with this maternal dosage regimen at 2 weeks and 2 months of age, respectively.[7]

In 1 mother who was 11 weeks postpartum and taking fluoxetine in a daily dosage of 20 mg, the authors estimated that an exclusively breastfed infant would receive 3.3% of the maternal weight-adjusted dosage.[8]

At 2 months postpartum, 7 mothers taking an average of 24 mg of fluoxetine daily had average breastmilk levels of 63.7 mcg/L of fluoxetine and 103.8 mcg/L of norfluoxetine. These data indicate that a fully breastfed infant would receive 25 mcg/kg daily of fluoxetine plus norfluoxetine. This value would be about 6.3% of the maternal weight-adjusted dosage.[9]

Twenty-three nursing mothers who were taking fluoxetine in an average dose of 21 mg daily for a minimum of 4 weeks and averaging 3.7 months postpartum had random foremilk samples (n = 30) analyzed for R- and S-isomers of fluoxetine and norfluoxetine. The weight-adjusted dosages of these infants (average 91% breastfed) were calculated to be 0.54% and 0.57% of the maternal weight-adjusted dosage for fluoxetine and norfluoxetine, respectively. The concentrations of the active S-isomer in milk were about 1.9 times that of the R- isomer.[10]

Data from 24 women on the excretion of fluoxetine and norfluoxetine into milk from two previously published studies[11,12] were combined and reanalyzed using NONMEM. Data from the two original papers were previously included in a pooled analysis reported above.[6] Simulations of the data indicated that a fully breastfed infant would receive a median of 0.017 mg/kg daily of fluoxetine plus norfluoxetine. This resulted in a median weight-adjusted percentage of 5.9% of the maternal dosage, with a 99th percentile value of 23%.[13]

Four women taking fluoxetine 20 mg daily had an average breastmilk fluoxetine concentration of 51 mcg/L at times that were not stated. These values equated to an average infant dosage of 7.6 mcg/kg daily or 2.2% of the maternal weight-adjusted dosage.[14]

A nursing mother was taking fluoxetine 20 mg daily. Foremilk and hindmilk samples taken at 1 week postpartum, 2 hours after a dose contained 19 mcg/L and 16 mcg/L, respectively. The samples also contained 36 mcg/L and 30 mcg/L of norfluoxetine in foremilk and hindmilk, respectively.[15]

A mother taking 40 mg of fluoxetine daily since conception donated one mature breastmilk sample 4 hours after a dose. Fluoxetine concentration was 98.2 mcg/L and norfluoxetine was 56.3 mcg/L. In 17 women who received a single 20 mg dose of fluoxetine prepartum, colostrum samples taken 23 to 54 hours postpartum. Fluoxetine was found in 3 samples below the quantification level of 3 mcg/L and above the level of detection of 1 mcg/L; in all other samples fluoxetine was below the level of detection. Norfluoxetine was found in all the samples, but below the level of quantification of 4 mcg/L.[16]

Two women treated with fluoxetine 20 mg daily during the third trimester of pregnancy and during breastfeeding provided trough milk samples during the first week postpartum. Fluoxetine milk levels were 142.9 and 216.8 mcg/L, with calculated weight-adjusted percentage of maternal dosages 13.1% and 20%, respectively. These values might be inaccurate because of the timing of milk sample collection and the failure to quantitate norfluoxetine.[17]

Infant Levels. In a pooled analysis of 22 mother-infant pairs from published and unpublished cases, the authors found that infants had an average of 7% (range 0 to 59%) of their mothers’ fluoxetine plasma levels; 4 of the 22 infants (18%) had a plasma level greater than 10% of the mothers’ which was defined by the authors as being elevated.[6]

An infant whose mother restarted fluoxetine at 63 days postpartum had blood drawn after 2 days of breastfeeding. The infant’s fluoxetine level was 340 mcg/L and norfluoxetine was 208 mcg/L.[18]

A mother took fluoxetine 40 mg daily during pregnancy and postpartum. Infant blood samples were taken two times. The first was at approximately 11 days of age. The fluoxetine concentration was less than 40 mcg/L and norfluoxetine was 142 mcg/L. Eight days later after breastfeeding was discontinued, the infant’s fluoxetine concentration was less than 40 mcg/L and norfluoxetine was 86 mcg/L.[19]

Eleven breastfed (6 exclusively; 5 supplemented) infants with an average age of 24.6 weeks (range 5 to 36 weeks) whose mothers were taking an average of 27.3 mg daily of fluoxetine all had measurable norfluoxetine serum levels averaging 3.2 mcg/L (range 1.4 to 8.7 mcg/L) which was 3.2% of average maternal norfluoxetine serum levels. One infant also had a detectable fluoxetine level of 2.6 mcg/L.[20]

The breastfed (extent not stated) infants of 11 women taking fluoxetine 20 to 40 mg daily during pregnancy and lactation had trough milk fluoxetine and norfluoxetine levels measured on day 4, week 2 and month 2 postpartum. At 2 weeks of age, fluoxetine was detectable in the serum of 2 of the infants in concentrations of 7.1% of the average maternal serum level. Norfluoxetine was detectable in the serum of all infants in average concentrations of 38% of the average maternal serum level. At 2 months of age, no infant had detectable fluoxetine levels; norfluoxetine was detectable in the serum of all infants in concentrations averaging 6.5% of the average maternal serum level.[7]

At 2 months postpartum, the breastfed infants of 7 mothers taking an average of 24 mg of fluoxetine daily had an average serum levels of 2 mcg/L of fluoxetine and 8.5 mcg/L of norfluoxetine which was about 9% of the maternal serum norfluoxetine level.[9]

Thirty serum levels were obtained from 23 infants with an average age of 3.7 months and breastfed an average of 91% by mothers who had been taking fluoxetine in an average dose of 21 mg daily for at least 4 weeks. Six of 7 infants had detectable serum levels in the first month, 6 of 8 in the second month and 2 of 14 thereafter. The ratio of infant to maternal serum levels of fluoxetine plus S-norfluoxetine dropped rapidly during the first month and was less than 10% by 2 months of age. Infant serum levels of S-fluoxetine and S-norfluoxetine were about 3 times as high as the R-isomers during the first 2 months. Only norfluoxetine could be detected after this time and the S- to R-isomer ratio fell to about 1.4.[10]

A woman was taking fluoxetine 40 mg daily during pregnancy and postpartum for depression. She breastfed (extent not stated) her infant. The infant had fluoxetine and norfluoxetine concentrations at age 7 days of 17.2 and 108 mcg/L, respectively.[21] It is likely that a portion of this concentration is attributable to placental transfer.

### Effects in Breastfed Infants

Colic, decreased sleep, vomiting and watery stools occurred in a 6-day-old breastfed infant probably caused by maternal fluoxetine.[18] Two other reports of colic in breastfed infants, a 1.76-month-old and a 2-month-old, were possibly caused by fluoxetine in breastmilk. The older of the two also exhibited hyperactivity.[11]

Another case of possible increased irritability in a 3-month-old was noted by a pediatrician observer, who was the infant’s father. However, the mother and the infant’s pediatrician disagreed.[22]

Occurrence of hyperglycemia and glycosuria in a 5-month-old, possibly from fluoxetine in breastmilk was reported to the Australian Adverse Drug Reaction Advisory Committee.[23]

A 3-day-old breastfed infant was difficult to arouse, ceased rooting behavior, decreased nursing, and was moaning and grunting. Although the infant had been exposed in utero and was somewhat drowsy during the first 2 days of life, symptoms became worse after the mother’s milk came in on day 3. These effects were probably caused by fluoxetine in breastmilk.[19]

Possible drug-induced seizure-like activity and cyanosis occurred in a breastfed 3-week-old breastfed infant whose mother was taking fluoxetine, carbamazepine and buspirone during pregnancy and breastfeeding.[24]

One observational report of 4 infants found no apparent neurological abnormalities following exposure to fluoxetine in milk for 12 to 52 weeks.[25]

A retrospective, case-control, cohort study compared the weights of the infants of mothers who took fluoxetine during pregnancy and breastfed for at least 2 weeks postpartum to the infants of mothers who took fluoxetine during pregnancy and did not breastfeed. Compared to controls, decreased weight gain occurred among the 26 infants exposed postpartum to fluoxetine in breastmilk, although the weights were still in the normal range.[26]

A prospective study of 51 nursing women taking fluoxetine and 63 nursing women who took no fluoxetine found no effect on weight gain, but reported a greater frequency of unspecified side effects in the infants of mothers who took fluoxetine.[27] This study’s results have been reported only in abstract form, so some details are lacking.

In a prospective study of 40 women who took fluoxetine throughout pregnancy, 21 breastfed their infants (extent and duration not stated). Testing of the infants at 15 to 71 months of age found no differences in cognitive, language or temperament measurements between infants who were breastfed and those who were not.[28]

In a study comparing the 31 infants of depressed mothers who took an SSRI during pregnancy for major depression with 13 infants of depressed mothers who did not take an SSRI, mental development and most motor development in both groups was normal at follow-up averaging 12.9 months. Three of the treated mothers took fluoxetine in doses averaging 23.3 mg daily for an average of 3 months while breastfeeding their infants. Psychomotor development was slightly delayed compared to controls, but the contribution of breastfeeding to abnormal development could not be determined.[29]

Platelet serotonin levels were measured in 11 mothers and their breastfed infants after 4 to 12 weeks of fluoxetine therapy. Platelets and neurons both have the same serotonin transporter, so this effect on platelet serotonin might indicate potential effects on the nervous system of some breastfed infants. Maternal fluoxetine dosages ranged from 20 to 40 mg daily. Ten of the infants were under 6 months of age and 4 were under 3 months of age at the start of therapy; 6 were exclusively breastfed. Although maternal platelet serotonin levels were decreased from 157 mcg/L to 23 mcg/L by fluoxetine therapy, average infant serotonin levels were 217 mcg/L before and 230 mcg/L after maternal therapy. These findings indicate that the amount of fluoxetine ingested by the infants was not sufficient to affect serotonin transport in platelets in most breastfed infants. However, 3 infants experienced drops in platelet serotonin of 13, 24 and 60%, respectively. The latter infant was the only one with measurable fluoxetine plasma levels as well as norfluoxetine, but the infant had no discernible adverse effects. One other infant had a delay in motor development at 24 weeks, but had normal mental development; 6 other infants were within 1 standard deviation of normal in both measures when tested between 24 and 56 weeks of age.[20]

Twenty-nine mothers who took fluoxetine in an average dosage of 34.6 mg daily for depression or anxiety starting no later than 4 weeks postpartum, breastfed their infants exclusively for 4 months and at least 50% during months 5 and 6. Their infants had 6-month weight gains that were normal according to national growth standards and mothers reported no abnormal effects in their infants.[30]

One study of side effects of SSRI antidepressants in nursing mothers found no adverse reactions that required medical attention in one infant whose mother was taking fluoxetine. No specific information on maternal fluoxetine dosage, extent of breastfeeding or infant age was reported.[31]

Eleven infants who were breastfed (extent and duration not stated) during maternal use of fluoxetine for depression (n = 5) or panic disorder (n = 6) had normal weight gain at 12 months of age that was not significantly different from a control group of infants whose mothers took no psychotropic medications. Neurologic development was also normal at 12 months of age.[7]

In 1 breastfed (extent not stated) infant aged 11 weeks whose mother was taking fluoxetine 20 mg daily, no adverse reactions were noted clinically at the time of the study.[8]

A small study compared the reaction to pain in infants of depressed mothers who had taken an SSRI during pregnancy alone or during pregnancy and nursing to a control group of unexposed infants of nondepressed mothers. Infants exposed to an SSRI either prenatally alone or prenatally and postnatally via breastmilk had blunted responses to pain compared to control infants. Seven of the 30 infants were exposed to fluoxetine. Because there was no control group of depressed, nonmedicated mothers, an effect due to maternal behavior caused by depression could not be ruled out. The authors stressed that these findings did not warrant avoiding drug treatment of depression during pregnancy or avoiding breastfeeding during SSRI treatment.[9]

An infant was born to a mother taking fluoxetine 40 mg daily, oxycodone 20 mg 3 times daily, and quetiapine 400 mg daily. The infant was breastfed 6 to 7 times daily and was receiving 120 mcg of oral morphine 3 times daily for opiate withdrawal. Upon examination at 3 months of age, the infant’s weight was at the 25th percentile for age, having been at the 50th percentile at birth. The authors attributed the weight loss to opiate withdrawal. The infant’s Denver developmental score was equal to his chronological age.[32]

An uncontrolled online survey compiled data on 930 mothers who nursed their infants while taking an antidepressant. Infant drug discontinuation symptoms (e.g., irritability, low body temperature, uncontrollable crying, eating and sleeping disorders) were reported in about 10% of infants. Mothers who took antidepressants only during breastfeeding were much less likely to notice symptoms of drug discontinuation in their infants than those who took the drug in pregnancy and lactation.[33]

A cohort of 247 infants exposed to an antidepressant in utero during the third trimester of pregnancy were assessed for poor neonatal adaptation (PNA). Of the 247 infants, 154 developed PNA. Infants who were exclusively given formula had about 3 times the risk of developing PNA as those who were exclusively or partially breastfed. Fifteen of the infants were exposed to fluoxetine in utero.[34]

A late preterm infant was born to a mother who took fluoxetine 60 mg daily throughout pregnancy and during exclusive breastfeeding. At 7 days of age, the infant was found to be having jerking movements, with hypertonia and hyperreflexia as well as tachypnea and compensated metabolic acidosis. The infant’s Finnegan scores were the range of 7 to 10. On day 8 of life, the infant had a serum fluoxetine level of 120 mcg/L, which is similar to therapeutic adult levels. Breastfeeding was discontinued and after 5 days of formula feeding the infant’s Finnegan scores had decreased to a range of 3 to 6. After 10 days of formula, most symptoms had subsided. At 3 months of age, the infant was growing and developing normally. The infant’s symptoms were attributed to serotonin syndrome caused by the high levels of fluoxetine rather than to withdrawal.[35] The reaction was probably caused by fluoxetine and breastfeeding might have contributed to maintaining the high fluoxetine levels after birth.

A woman with narcolepsy took sodium oxybate 4 grams each night at 10 pm and 2 am as well as fluoxetine 20 mg and cetirizine 5 mg daily throughout pregnancy and postpartum. She breastfed her infant except for 4 hours after the 10 pm oxybate dose and 4 hours after the 2 am dose. She either pumped breastmilk or breastfed her infant just before each dose of oxybate. The infant was exclusively breastfed, or breastmilk fed for 6 months when solids were introduced. The infant was evaluated at 2, 4 and 6 months with the Ages and Stages Questionnaires, which were withing the normal range as were the infant’s growth and pediatrician’s clinical impressions regarding the infant’s growth and development.[36]

Two women were treated with fluoxetine 20 mg daily during the third trimester of pregnancy and during breastfeeding. Pediatric evaluations including neurologic assessments and brain ultrasound were conducted during the first 24 hours postpartum. Further follow-up was conducted at 6 or more months of age. Infant clinical status was comparable to unexposed infants from the same pediatric department.[17]

A woman was taking fluoxetine 40 mg daily during pregnancy and postpartum for depression. She breastfed (extent not stated) her infant. A venous cord gas taken at delivery showed a pH of 7.38. At 45 minutes postpartum, the baby developed respiratory distress syndrome with mixed respiratory and metabolic acidosis, becoming cyanosed and floppy requiring admission to the neonatal unit. Glucose was 3.4 mmol/L on admission. Abnormal movements, tremor, and extensor posturing were present initially, but resolved within hours, although irritability and poor sleep were noted subsequently. The mother discontinued breastfeeding and the infant’s symptoms improved, although the infant had low levels of fluoxetine and norfluoxetine in his blood. The infant was discharged at age 16 days of age. The authors attributed the infant’s symptoms to a serotonin syndrome caused by fluoxetine.[21]

In a retrospective cohort study of 5,079 newborns whose mothers took an SSRI during pregnancy, 1.5% of breastfed newborns had neonatal withdrawal compared with 2.3% among the formula-fed newborns, although this did not reach statistical significance. Breastfed newborns had a reduced risk of transfer to the NICU than formula-fed newborns; however, this finding did not persist in sensitivity analysis. Twelve percent of women in the study were taking fluoxetine.[37] A further analysis of these data indicated that infants of mothers who took a SSRI during pregnancy and exclusively breastfed had a greater risk of an emergency department visit or readmission to the hospital, primarily due to jaundice.[5]

A secondary analysis of a population study evaluated infant IQ scores with SSRI use postpartum during nursing (n = 22), non-SSRI exposed breastfed infants (n = 37), and non-breastfed infants (n = 38). Of the entire group of mothers, 81 mothers were treated with fluoxetine, 9 with sertraline, 8 with paroxetine, and 2 with citalopram. Children had IQ testing at a mean age of 4.9 years. There were no significant differences in any adjusted mean IQ scores between breastfed children with and without postnatal SSRI exposure.[38]

A pilot study compared the stool of breastfed infants whose mothers were taking an SSRI antidepressant to those of infants whose mothers were not taking an SSRI. Two of the 10 women taking an SSRI were taking fluoxetine. The stools of infants exposed to an SSRI in milk had increases in the genera Gemella, Staphylococcus and Corynebacterium and a decrease in Lactobacillus.[39]

### Effects on Lactation and Breastmilk

Fluoxetine has caused increased prolactin levels and galactorrhea in nonpregnant, nonnursing patients.[40-48] Euprolactinemic galactorrhea has also been reported.[49] In a study of cases of hyperprolactinemia and its symptoms (e.g., gynecomastia) reported to a French pharmacovigilance center, fluoxetine was found to have a 3.6-fold increased risk of causing hyperprolactinemia compared to other drugs.[44] Preliminary animal and in vitro studies found that fluoxetine may have some estrogenic activity.[45] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

In a small prospective study, 8 primiparous women who were taking a serotonin reuptake inhibitor (SRI; 3 taking fluoxetine and 1 each taking citalopram, duloxetine, escitalopram, paroxetine or sertraline) were compared to 423 mothers who were not taking an SRI. Mothers taking an SRI had an onset of milk secretory activation (lactogenesis II) that was delayed by an average of 16.7 hours compared to controls (85.8 hours postpartum in the SRI-treated mothers and 69.1 h in the untreated mothers), which doubled the risk of delayed feeding behavior compared to the untreated group. However, the delay in lactogenesis II may not be clinically important, since there was no statistically significant difference between the groups in the percentage of mothers experiencing feeding difficulties after day 4 postpartum.[46]

A case control study compared the rate of predominant breastfeeding at 2 weeks postpartum in mothers who took an SSRI antidepressant throughout pregnancy and at delivery (n = 167) or an SSRI during pregnancy only (n = 117) to a control group of mothers who took no antidepressants (n = 182). Among the two groups who had taken an SSRI, 33 took citalopram, 18 took escitalopram, 63 took fluoxetine, 2 took fluvoxamine, 78 took paroxetine, and 87 took sertraline. Among the women who took an SSRI, the breastfeeding rate at 2 weeks postpartum was 27% to 33% lower than mother who did not take antidepressants, with no statistical difference in breastfeeding rates between the SSRI-exposed groups.[47]

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[50] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575; fluoxetine n = 21) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[51]

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[52]

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26.30601177
2 Larsen ER, Damkier P, Pedersen LH, . Use of psychotropic drugs during pregnancy and breast-feeding. Acta Psychiatr Scand Suppl 2015:1-28.
3 Grzeskowiak LE, Leggett C, Costi L, . Impact of serotonin reuptake inhibitor use on breast milk supply in mothers of preterm infants: A retrospective cohort study. Br J Clin Pharmacol 2018;84:1373-9.29522259
4 Wang J, Cosci F. Neonatal withdrawal syndrome following late in utero exposure to selective serotonin reuptake inhibitors: A systematic review and meta-analysis of observational studies. Psychother Psychosom 2021;90:299-307.33971648
5 Cantin C, Li W, Snelgrove-Clarke E, . Examining the effect of newborn feeding method on postnatal length of stay and healthcare utilisation among Neonates With In-utero SSRI Exposure (NeoWISE): a retrospective cohort study. BMJ Paediatr Open 2026;10
6 Weissman AM, Levy BT, Hartz AJ, . Pooled analysis of antidepressant levels in lactating mothers, breast milk, and nursing infants. Am J Psychiatry 2004;161:1066-78.15169695
7 Heikkinen T, Ekblad U, Palo P, . Pharmacokinetics of fluoxetine and norfluoxetine in pregnancy and lactation. Clin Pharmacol Ther 2003;73:330-7.12709723
8 Berle JØ, Steen VM, Aamo TO, . Breastfeeding during maternal antidepressant treatment with serotonin reuptake inhibitors: Infant exposure, clinical symptoms, and cytochrome P450 genotypes. J Clin Psychiatry 2004;65:1228-34.15367050
9 Oberlander TF, Grunau RE, Fitzgerald C, . Pain reactivity in 2-month-old infants after prenatal and postnatal serotonin reuptake inhibitor medication exposure. Pediatrics 2005;115:411-25.15687451
10 Kim J, Riggs KW, Misri S, . Stereoselective disposition of fluoxetine and norfluoxetine during pregnancy and breast-feeding. Br J Clin Pharmacol 2006;61:155-63.16433870
11 Kristensen JH, Ilett KF, Hackett LP, . Distribution and excretion of fluoxetine and norfluoxetine in human milk. Br J Clin Pharmacol 1999;48:521-7.10583022
12 Taddio A, Ito S, Koren G. Excretion of fluoxetine and its metabolite, norfluoxetine, in human breast milk. J Clin Pharmacol 1996;36:42-7.8932542
13 Tanoshima R, Bournissen FG, Tanigawara Y, . Population PK modelling and simulation based on fluoxetine and norfluoxetine concentrations in milk: A milk concentration-based prediction model. Br J Clin Pharmacol 2014;78:918-28.24773313
14 Salazar FR, D’Avila FB, de Oliveira MH, . Development and validation of a bioanalytical method for five antidepressants in human milk by LC-MS. J Pharm Biomed Anal 2016;129:502-8.27497651
15 Weisskopf E, Panchaud A, Nguyen KA, . Simultaneous determination of selective serotonin reuptake inhibitors and their main metabolites in human breast milk by liquid chromatography-electrospray mass spectrometry. J Chromatogr B Analyt Technol Biomed Life Sci 2017;1057:101-9.
16 Lopes BR, Cassiano NM, Carvalho DM, . Simultaneous quantification of fluoxetine and norfluoxetine in colostrum and mature human milk using a 2-dimensional liquid chromatography-tandem mass spectrometry system. J Pharm Biomed Anal 2018;150:362-7.29287263
17 Pogliani L, Baldelli S, Cattaneo D, . Selective serotonin reuptake inhibitors passage into human milk of lactating women. J Matern Fetal Neonatal Med 2019;32:3020-5.29557689
18 Lester BM, Cucca J, Andreozzi L, . Possible association between fluoxetine hydrochloride and colic in an infant. J Am Acad Child Adolesc Psychiatry 1993;32:1253-5.8282672
19 Hale TW, Shum S, Grossberg M. Fluoxetine toxicity in a breastfed infant. Clin Pediatr (Phila) 2001;40:681-4.11771923
20 Epperson CN, Jatlow PI, Czarkowski K, . Maternal fluoxetine treatment in the postpartum period: effects on platelet serotonin and plasma drug levels in breastfeeding mother-infant pairs. Pediatrics 2003;112:e425-9.14595087
21 Keymer NI, Phakey A, Bradberry SM, . Fluoxetine toxicity in a neonate due to maternal exposure with apparent improvement on cessation of breastfeeding. Clin Toxicol 2023;61 (Suppl 1):112. doi:10.1080/15563650.2023.2192024
22 Isenberg KE. Excretion of fluoxetine in human breast milk. J Clin Psychiatry 1990;51:169.
23 Rohan A. Drug distribution in human milk. Aust Prescr 1997;20:84.
24 Brent NB, Wisner KL. Fluoxetine and carbamazepine concentrations in a nursing mother/infant pair. Clin Pediatr (Phila) 1998;37:41-4.9475699
25 Yoshida K, Smith B, Craggs M, . Fluoxetine in breast-milk and developmental outcome of breast-fed infants. Br J Psychiatry 1998;172:175-8.9519072
26 Chambers CD, Anderson PO, Thomas RG, . Weight gain in infants breastfed by mothers who take fluoxetine. Pediatrics 1999;104:e61.10545587
27 Moretti ME, Sharma A, Bar-Oz B, . Fluoxetine and its effects on the nursing infant: A prospective cohort. Clin Pharmacol Ther 1999;65:141. doi:10.1016/S0009-9236(99)80095-2
28 Nulman I, Koren G. The safety of fluoxetine during pregnancy and lactation. Teratology 1996;53:304-8.8879088
29 Casper RC, Fleisher BE, Lee-Ancajas JC, . Follow-up of children of depressed mothers exposed or not exposed to antidepressant drugs during pregnancy. J Pediatr 2003;142:402-8.12712058
30 Hendrick V, Smith LM, Hwang S, . Weight gain in breastfed infants of mothers taking antidepressant medications. J Clin Psychiatry 2003;64:410-2.12716242
31 Lee A, Woo J, Ito S. Frequency of infant adverse events that are associated with citalopram use during breast-feeding. Am J Obstet Gynecol 2004;190:218-21.14749663
32 Rampono J, Kristensen JH, Ilett KF, . Quetiapine and breast feeding. Ann Pharmacother 2007;41:711-4.17374621
33 Hale TW, Kendall-Tackett K, Cong Z, . Discontinuation syndrome in newborns whose mothers took antidepressants while pregnant or breastfeeding. Breastfeed Med 2010;5:283-8.20807106
34 Kieviet N, Hoppenbrouwers C, Dolman KM, . Risk factors for poor neonatal adaptation after exposure to antidepressants in utero. Acta Paediatr 2015;104:384-91.25559357
35 Morris R, Matthes J. Serotonin syndrome in a breast-fed neonate. BMJ Case Rep 2015;2015:bcr2015209418.
36 Gashlin LZ, Sullo D, Lawrence RA, . Treatment of narcolepsy with sodium oxybate while breastfeeding: A case report. Breastfeed Med 2016;11:261-3.27057786
37 Cantin C, Li W, Snelgrove-Clarke E, . Neonates With In-Utero SSRI Exposure (NeoWISE): A retrospective cohort study examining the effect of newborn feeding method on newborn withdrawal. Int J Popul Data Sci 2024;9:2458.39679336
38 Heinonen EW, Kao K, Mattson SN, . Cognitive outcomes of children exposed to selective serotonin reuptake inhibitors through breast milk. JAMA Netw Open 2025;8:e2544989.41269692
39 Desorcy-Scherer K, McNamara K, Luellwitz R, . Early insights into maternal antidepressant use and the human infant gut microbiome. Biol Res Nurs 2026;28:406-17.41652998
40 Arya DK, Taylor WS. Lactation associated with fluoxetine treatment. Aust N Z J Psychiatry 1995;29:697.8825840
41 Egberts AC, Meyboom RH, De Koning FH, . Non-puerperal lactation associated with antidepressant drug use. Br J Clin Pharmacol 1997;44:277-81.9296322
42 Iancu I, Ratzoni G, Weitzman A, . More fluoxetine experience. J Am Acad Child Adolesc Psychiatry 1992;31:755-6.1644743
43 Peterson MC. Reversible galactorrhea and prolactin elevation related to fluoxetine use. Mayo Clin Proc 2001;76:215-6.11213313
44 Trenque T, Herlem E, Auriche P, . Serotonin reuptake inhibitors and hyperprolactinaemia: A case/non-case study in the French pharmacovigilance database. Drug Saf 2011;34:1161-6.22077504
45 Müller JC, Imazaki PH, Boareto AC, . In vivo and in vitro estrogenic activity of the antidepressant fluoxetine. Reprod Toxicol 2012;34:80-5.22522098
46 Marshall AM, Nommsen-Rivers LA, Hernandez LL, . Serotonin transport and metabolism in the mammary gland modulates secretory activation and involution. J Clin Endocrinol Metab 2010;95:837-46.19965920
47 Gorman JR, Kao K, Chambers CD. Breastfeeding among women exposed to antidepressants during pregnancy. J Hum Lact 2012;28:181-8.22344850
48 Suthar N, Pareek V, Nebhinani N, . Galactorrhea with antidepressants: A case series. Indian J Psychiatry 2018;60:145-6.29736080
49 Kaba D, Oner O. Galactorrhea after selective serotonin reuptake inhibitor use in an adolescent girl: A case report. J Clin Psychopharmacol 2017;37:374-6.
50 Venkatesh KK, Castro VM, Perlis RH, . Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol 2017;37:1003-9.28682318
51 Leggett C, Costi L, Morrison JL, . Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact 2017;33:701-9.28984528
52 Grzeskowiak LE, Saha MR, Nordeng H, . Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand 2022;101:344-54.35170756

## Substance Identification

### Substance Name

Fluoxetine

### CAS Registry Number

54910-89-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Serotonin Uptake Inhibitors